# Drospirenone

CASRN: 67392-87-4

## Drug Levels and Effects

### Summary of Use during Lactation

Drospirenone is a progestin that is an analogue of spironolactone. It has antimineralocorticoid and antiandrogenic activities. Amounts in milk are very low and no adverse effects on the breasted infant or milk supply are expected. Expert opinion holds that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1,2] For further information, consult the record entitled, Contraceptives, Oral, Combined.

### Drug Levels

Maternal Levels. Six women who were between 1 week and 3 months postpartum received a single dose of drospirenone 3 mg plus ethinyl estradiol 30 mcg. Milk was collected for 72 hours after the dose in 2 of the women in whom half-lives in breastmilk were 8.3 and 15.5 hours. The average peak milk level in the 6 women was 13.5 mcg/L at 2.8 hours after the dose. The average drospirenone milk level in the first 24 hours was 3.7 mcg/L (range 1.4 to 7 mcg/L). The authors estimated that a fully breastfed infant would receive a drospirenone dose of about 3 mcg daily.[3] Using the average milk level of drospirenone, an exclusively breastfed infant would receive 1.1% of the weight-adjusted maternal dosage of drospirenone.

Twelve women who had weaned their infants, but were still lactating were given non-micronized oral drospirenone 4 mg daily (Slinda-Exeltis, Germany). Blood and milk samples were obtained at 12 time points up to 120 hours after at least 7 days of use. The average peak concentration in milk was 10.3 mcg/L at 3 hours after the dose and the average milk concentration over 24 hours would be 5.6 mcg/L. Using the standard milk intake value of 150 mL/kg daily, the infant would receive an average of 0.84 mcg/kg of drospirenone daily, which represent a weight-adjusted relative infant dose of 1.25% of the maternal dose.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
2 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
3 Blode H, Foidart JM, Heithecker R. Transfer of drospirenone to breast milk after a single oral administration of 3 mg drospirenone + 30 mcg ethinylestradiol to healthy lactating women. Eur J Contracept Reprod Health Care 2001;6:167–71.11763981
4 Melka D, Kask K, Colli E, et al. A single-arm study to evaluate the transfer of drospirenone to breast milk after reaching steady state, following oral administration of 4 mg drospirenone in healthy lactating female volunteers. Womens Health (Lond) 2020;16:1745506520957192.32903172

## Substance Identification

### Substance Name

Drospirenone

### CAS Registry Number

67392-87-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Aldosterone Antagonists

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic

Mineralocorticoid Receptor Antagonists